# Maralixibat

CASRN: 716313-53-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of maralixibat during breastfeeding. Because maralixibat is poorly absorbed orally and 90% bound to plasma proteins, the amount in milk is likely to be low. If maralixibat is required by the mother, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Maralixibat

### CAS Registry Number

716313-53-0

### Drug Class

Breast Feeding

Lactation

Milk, Human